# Vitamin B_12_

CASRN: 68-19-9

## Drug Levels and Effects

### Summary of Use during Lactation

Vitamin B_12_ is a normal component of human milk.[1] The recommended daily intake in lactating women is 2.8 mcg and for infants aged 6 months or less is 0.4 mcg.[2] Some authorities recommend 5.5 mcg per day during lactation.[3] Supplementation may be necessary to achieve these recommended daily intakes or to correct a known deficiency. Low doses (1 to 10 mcg) of vitamin B_12_ found in B complex or prenatal vitamins increase milk levels only slightly. Higher daily doses of 50 to 250 mcg are needed in cases of maternal deficiency. The breastfed infant is not exposed to excessive vitamin B_12_ in such cases, and their vitamin B_12_ status should improve if it was previously inadequate.

Poor health outcomes in infants with vitamin B_12_ deficiency include anemia, abnormal skin and hair development, convulsions, weak muscle tone, failure to thrive, mental developmental delay, and potentially abnormal movements.[4-8] Well-recognized at risk groups are exclusively breastfed infants of mothers with B_12_ deficiency due to minimal or no dietary intake of animal products[9-21] or pernicious anemia caused by a maternal malabsorption of B_12_.[18,22] Infant vitamin B_12_ status can be improved through maternal B_12_ supplementation during pregnancy and lactation.[23-26] Deficient mothers who miss the opportunity to supplement during pregnancy should still be encouraged to supplement during early lactation since infant vitamin B_12_ status correlates with milk vitamin B_12_ levels in breastfed infants up to 6 months of age.[27-30] Although there are cases reported of exclusively breastfed infants with vitamin B_12_ deficiency having biochemical and clinical improvement through adequate maternal supplementation alone,[9] direct supplementation of the infant is recommended when such treatments are available.[31-33]

### Drug Levels

Methylcobalamin is the major form of vitamin B_12_ in milk. Deoxyadenosylcobalamin, hydroxocobalamin and cyanocobalamin are minor forms.[1] When measured in milk, all forms or "total" vitamin B_12_ levels are reported. Breastmilk vitamin B_12_ levels are correlated with maternal intake and maternal blood levels.[34,35] Infant vitamin B_12_ levels are correlated with maternal blood and milk levels.[36] Infant vitamin B_12_ blood levels are significantly lower, and the rate of vitamin B_12_ deficiency is significantly higher, in exclusively breastfed infants compared to those who are exclusively formula fed.[37]

A vitamin B_12_ blood level <150 pmol/L (<203 ng/L) is considered a biochemical indicator of deficiency.[38] A blood level >220 pmol/L (>298 ng/L) indicates adequate vitamin B_12_ status, and values between 150 and 220 pmol/L are considered marginally adequate.[23,39] These are traditional epidemiological cutoffs and not necessarily diagnostic. Numerous laboratory tests in addition to vitamin B_12_ blood levels and clinical examination are used to diagnose vitamin B_12_ deficiency.[40,41]

Maternal Levels. Average milk levels in mature milk are 200 to 700 pmol/L (270 to 950 ng/L) during the first 28 weeks postpartum in healthy, lactating women with known or presumed adequate vitamin B_12_ status and not taking a supplement.[27,28,42-45] Levels are highest during the first 4 weeks postpartum and gradually decrease thereafter.[25,28,29,42-47] Hindmilk levels are 20% to 30% higher than foremilk.[29]

In populations with a high prevalence of vitamin B_12_ deficiency or insufficient dietary vitamin B_12_ intake, reported median or average milk levels are 120 to 160 pmol/L (160 to 220 ng/L) at 6 months postpartum.[30,46] In one study of 210 lactating women from different regions of Cameroon, rates of maternal vitamin B_12_ deficiency were 15% to 25% and median milk levels were between 47 and 236 pmol/L (64 and 320 ng/L). Levels were lowest in regions with the highest rates of maternal vitamin B_12_ deficiency. In women with confirmed deficiency, milk levels are typically less than 100 pmol/L (135 ng/L).[9,12,39] A lower milk level threshold of 310 pmol/L (420 ng/L) for adequate infant B_12_ intake has been suggested.[28]

Three mothers in India with vitamin B_12_deficiency due to very low dietary intake were given a single 50 mcg intramuscular injection of vitamin B_12_. Their milk levels increased from 40 to 70 pmol/L (54 to 95 ng/L) prior to the dose to around 1,000 pmol/L (1,350 ng/L) later that same day or the next day. Levels then decreased each day thereafter to baseline 3 to 5 days after the dose.[9] Based on the milk levels reported, the three infants in this study received approximately 0.1 mcg/kg daily of extra vitamin B_12_ in breastmilk for 4 to 5 days after the maternal dose.

Three hundred sixty-six pregnant women in India received 50 mcg oral vitamin B_12_ or placebo once daily beginning during their first trimester of pregnancy and continuing until 6 weeks postpartum. Three quarters of all mothers had less than adequate vitamin B_12_ blood levels at baseline and there were no differences between the two groups. Among 141 mothers who provided milk samples, the median breastmilk vitamin B_12_ level at 6 weeks postpartum was 136 pmol/L (184 ng/L) in the supplemented group and 87 pmol/L (118 ng/L) in the placebo group. After treatment discontinuation, milk levels decreased to 97 and 68 pmol/L (131 and 92 ng/L), respectively, at 3 months and 106 and 80 pmol/L (144 and 108 ng/L), respectively, at 6 months postpartum. Only the 6-week levels were significantly different between the two groups.[23] Based on the 49 pmol/L (66 ng/L) difference in median milk levels reported at 6 weeks, exclusively breastfed infants would receive an extra 0.01 mcg/kg daily of vitamin B_12_ from maternal 50 mcg once daily oral supplementation.

Sixty-eight pregnant women in Bangladesh received 250 mcg oral vitamin B_12_ or placebo once daily beginning during their first trimester of pregnancy and continuing until 3 months postpartum. At baseline, 67% of all enrolled women had less than adequate vitamin B_12_ blood levels and there were no differences between the two groups. Median vitamin B_12_ levels were significantly higher in the supplemented mothers compared to placebo. Colostrum levels were 778 and 320 pmol/L (1,054 and 434 ng/L), respectively, and at 3 months postpartum were 235 and 170 pmol/L (318 and 230 ng/L), respectively.[25] Based on the 65 pmol/L (88 ng/L) difference in median milk levels reported at 3 months, exclusively breastfed infants would receive an extra 0.013 mcg/kg daily of vitamin B_12_ from maternal 250 mcg once daily oral supplementation.

One hundred twenty-four pregnant women in Canada received 12 mcg of oral vitamin B_12_ once daily beginning at 13 to 22 weeks gestation and continuing through 8 weeks postpartum when blood and breastmilk were sampled for vitamin B_12_ measurement. None of the mothers had deficient blood vitamin B_12_ levels and only one mother had a marginal level. The average breastmilk vitamin B_12_ level was 452 pmol/L (612 ng/L). These findings were compared to 69 mothers in Cambodia who were not given a vitamin B_12_ supplement during pregnancy or lactation, and who had blood and milk collected one time between 3 and 27 weeks postpartum. Only one had a deficient vitamin B_12_ blood level and one mother had a marginal level. The average milk vitamin B_12_ level was 317 pmol/L (430 ng/L). The lower milk level in the Cambodian study group was possibly related to most of the samples being collected at later postpartum time points. A subanalysis determined that milk sampled on or before 8 weeks postpartum had an average level of 427 pmol/L (579 ng/L) compared to 286 pmol/L (388 ng/L) when sampled after 8 weeks.[28]

Ten women in Texas received an oral multivitamin tablet supplement containing 8 mcg of vitamin B_12_ beginning on the day of delivery. Foremilk was sampled once daily on postpartum days 5 to 7 and again on days 43 to 45. Maternal blood was sampled on day 7 and 45. Seven women who were not given a supplement served as a control group. All of the mothers had adequate vitamin B_12_ status and blood vitamin B_12_ levels were not different between the two groups at baseline. At the first measurement, average milk levels were approximately 1,200 pmol/L (1,650 ng/L) in the supplemented group and 900 pmol/L (1,220 ng/L) in the nonsupplemented group. At the second measurement, average levels were 800 and 450 pmol/L (1,100 and 610 ng/L), respectively.[40] Based on the 6 week postpartum results, an exclusively breastfed infant would receive an extra 0.07 mcg/kg daily of vitamin B_12_ in milk from the maternal supplement. The same research group conducted a similar study in 12 different postpartum women beginning 1 to 3 months after delivery; 6 received the daily supplement and 6 did not. At 6 months postpartum, average milk vitamin B_12_ levels were 640 and 470 pmol/L (866 and 642 ng/L), respectively, and were not significantly different.[48]

Average milk vitamin B_12_ levels in 25 Danish mothers ranged from 300 to 700 pmol/L (405 to 950 ng/L) from 2 weeks to 9 months postpartum. Most (>50%) mothers were taking a daily multivitamin supplement containing a low dose of 1 to 4.5 mcg vitamin B_12_.[29]

One hundred eighty-three mothers in Malawi were given a daily multinutrient supplement containing 2.6 mcg vitamin B_12_ beginning during the first week postpartum. A control group of 177 mothers was given no supplement. The median milk level at a composite time period of 2 or 6 weeks postpartum was 410 pmol/L (555 ng/L) in the supplemented group and 330 pmol/L (447 ng/L) in the control group. At 24 weeks postpartum the levels were 320 and 240 pmol/L (434 and 325 ng/L), respectively. Mothers who also took antiretroviral drugs for HIV infection had vitamin B_12_ milk levels similar to control.[49] Based on these reported milk levels, an exclusively breastfed infant would receive an extra 0.016 mcg/kg daily of vitamin B_12_ from the daily maternal supplemental 2.6 mcg.

One hundred seventy-three breastfeeding mothers in Norway provided samples of foremilk and hindmilk, each collected twice by manual expression after a morning and afternoon meal on a single day. The total of four samples from each mother were pooled and analyzed for vitamin B_12_ content. All had adequate vitamin B_12_ intake and were well nourished. The average milk B_12_ level among all the participants was 327 pmol/L (443 ng/L) ranging from 140 to 1089 pmol/L (190 to 1476 ng/L). The average postpartum date of collection was 11 weeks and ranged from 1 to 6 months. The average milk level was highest in mothers at 1 month postpartum, 402 pmol/L (545 ng/L), and lowest at 6 months, 299 pmol/L (405 ng/L). Levels did not significantly differ between those mothers who, according to a dietary questionnaire, took vitamin supplements containing B_12_ compared to those who did not, although the B_12_ supplemental dose was only 3 mcg per day.[45]

Four hundred ninety-one pregnancy women in Dar-es-Salaam, Tanzania were randomized to receive a daily multivitamin supplement containing 50 mcg vitamin B_12_ or placebo from 20 weeks gestation. At six weeks postpartum, when a single breastmilk sample was collected for vitamin B_12_ analysis. The median milk level was 229 pmol/L (309 ng/L) in the multivitamin group and 198 pmol/L (267 ng/L) in the placebo group, which were not significantly different. The proportion of milk samples below 310 pmol/L were 67% and 74%, respectively, which were also not significantly different. Mothers in this study were not undernourished, consumed animal protein, and had adequate vitamin B_12_ intake during pregnancy and postpartum according to responses given to dietary questionnaires. The authors considered the unexpected equivocal results possibly due to undocumented deficient maternal B_12_ liver stores or gastrointestinal malabsorption.[50]

Forty-eight vegan and vegetarian mothers in the U.S. had a single milk vitamin B_12_ level measured after 2 weeks postpartum. The median level in the group was approximately 500 pmol/L (678 ng/L). Eighty percent were taking a vitamin B_12_ supplement. Twenty-six nonvegetarians had a similar median milk value, and 69% used a supplement, but fewer were taking single ingredient B_12_ supplements. Among all participants, the use of individual vitamin B_12_ supplements with a daily dose range between 100 and 5000 mcg was a significant positive predictor of milk vitamin B_12_ concentration. The use of B complex or prenatal vitamins was not predictive.[24] This study raises the possibility that mothers with dietary restrictions limiting vitamin B_12_ intake can achieve milk vitamin B_12_ levels equal to nonlimited mothers if they are sufficiently supplemented.

Infant Levels. Three hundred sixty-six pregnant women in India received 50 mcg of oral vitamin B_12_ or placebo capsules once daily beginning during their first trimester of pregnancy and continuing until 6 weeks postpartum. Three quarters of all mothers had less than adequate vitamin B_12_ blood levels at baseline. Among the 77 infants tested at 6 weeks of age, the median blood vitamin B_12_ level was 199 pmol/L (270 ng/L) in the supplemented group and 139 pmol/L (188 ng/L) in the placebo group.[23]

Sixty-eight pregnant women in Bangladesh received 250 mcg oral vitamin B_12_ capsules or placebo once daily beginning during their first trimester of pregnancy and continuing until 3 months postpartum. At baseline, 66% of all enrolled women had less than adequate vitamin B_12_ blood levels and there were no differences between the two groups. The median cord blood vitamin B_12_ level was 555 pmol/L (752 ng/L) in the supplemented group and 208 pmol/L (282 ng/L) in the placebo group. At 3 months postpartum, the median infant blood levels were 328 and 200 pmol/L (444 and 271 ng/L), respectively. At 3 months of age, 85% of infants in the supplemented group had adequate vitamin B_12_ blood levels compared to 36% in the placebo group.[25]

One hundred twenty-four pregnant women in Canada received 12 mcg oral vitamin B_12_ once daily beginning at 13 to 22 weeks gestation and continuing through 8 weeks postpartum. None of the mothers had deficient blood vitamin B_12_ levels and only one had a marginal level. All self-reported exclusive breastfeeding. The average infant blood vitamin B_12_ level at 8 weeks postpartum was 506 pmol/L (686 ng/L).[28]

Three hundred fifty-three infants born to women in Bangladesh taking a daily multinutrient supplement containing 2.6 mcg vitamin B_12_ from the first trimester of pregnancy through 3 months postpartum had a median blood vitamin B_12_ level at 6 months postpartum of 221 pmol/L (299 ng/L). Six hundred eighty other infants whose mothers took one of two different supplements that did not contain vitamin B_12_ during the same time period had median blood vitamin B_12_ levels of approximately 190 pmol/L (257 ng/L). The percentage of infants with vitamin B_12_ deficiency was 26% in those born to supplemented mothers, which was significantly lower than the 31% to 37% reported in those not given a vitamin B_12_ supplement. An equivalent percentage of infants were exclusively breastfed in each group.[51]

### Effects in Breastfed Infants

Twelve exclusively breastfed infants between 4 and 11 months of age had biochemical, hematological and clinical findings consistent with vitamin B_12_ deficiency. Their mothers received a 50 mcg single dose of intramuscular vitamin B_12_. Within 5 to 8 days after the dose, the infants experienced significantly increased hemoglobin and reticulocyte counts, normoblastic erythropoiesis, improved mental status, regression of abnormal skin pigmentation, and reduction in tremors.[9]

Three hundred sixty-six pregnant women in India received 50 mcg of oral vitamin B_12_ or placebo capsules once daily beginning during their first trimester of pregnancy and continuing until 6 weeks postpartum. Among 218 infants that underwent neurodevelopment testing at 30 months of age, those born to mothers randomized to vitamin B_12_ had higher expressive language scores than the placebo group when adjusted for baseline maternal vitamin B_12_ deficiency. Cognitive, receptive language and motor scores were not different between the two groups.[26] Neurophysiological assessments were then conducted at 6 years of age and there were no differences in the measured brain activity between the two groups.[52]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hampel D, Allen LH. Analyzing B-vitamins in human milk: Methodological approaches. Crit Rev Food Sci Nutr 2016;56:494-511.25591052
2 National Institutes of Health Office of Dietary Supplements. Vitamin B_12_ fact sheet for health professionals. 2018. https://ods.od.nih.gov/factsheets/VitaminB12-HealthProfessional/
3 Ströhle A, Richter M, González-Gross M, et al. The revised D-A-CH-reference values for the intake of vitamin B_12_: Prevention of deficiency and beyond. Mol Nutr Food Res 2019;63:e1801178.30657638
4 Özyürek H, Ince H, Tasdemir HA, et al. Involuntary movements in cobalamin deficiency. Klinische Padiatrie 2024;236:223-8.37380026
5 Wirthensohn M, Wehrli S, Ljungblad UW, et al. Biochemical, nutritional, and clinical parameters of vitamin B12 deficiency in infants: A systematic review and analysis of 292 cases published between 1962 and 2022. Nutrients 2023;15:4960.38068819
6 Barbaria W, Landolsi H, Guerrioui A, et al. A case of vitamin B12 deficiency in an exclusively breastfed child. Curr Pediatr Res 2023;27:1968-70. doi:10.35841/0971-9032.27.07.1968-1970
7 Shah UK, Chaudhary S, Ghimire A, et al. Infantile tremor syndrome with global developmental delay and microcephaly in a 16-month-old male: A case report. Ann Med Surg (Lond) 2024;86:3180-3.38694308
8 Lamouri I, Elouali A, Kamaoui I, et al. Vitamin B12 deficiency in infants with axial hypotonia and psychomotor regression: Insights from a Moroccan case study. Cureus 2024;16:e64000.39109106
9 Srikantia SG, Reddy V. Megaloblastic anaemia of infancy and vitamin B_12_. Br J Haematol 1967;13:949-53.6075449
10 Specker BL, Black A, Allen L, et al. Vitamin B-12: Low milk concentrations are related to low serum concentrations in vegetarian women and to methylmalonic aciduria in their infants. Am J Clin Nutr 1990;52:1073-6.2239784
11 Roumeliotis N, Dix D, Lipson A. Vitamin B(12) deficiency in infants secondary to maternal causes. CMAJ 2012;184:1593-8.22711730
12 Honzik T, Adamovicova M, Smolka V, et al. Clinical presentation and metabolic consequences in 40 breastfed infants with nutritional vitamin B_12_ deficiency--what have we learned? Eur J Paediatr Neurol 2010;14:488-95.20089427
13 Demir N, Koc A, Ustyol L, et al. Clinical and neurological findings of severe vitamin B_12_ deficiency in infancy and importance of early diagnosis and treatment. J Paediatr Child Health 2013;49:820-4.23781950
14 Bousselamti A, El Hasbaoui B, Echahdi H, et al. Psychomotor regression due to vitamin B_12_ deficiency. Pan Afr Med J 2018;30:152.30374398
15 Gowda VK, Kolli V, Benakappa A, et al. Case series of infantile tremor syndrome in tertiary care paediatric centre from southern India. J Trop Pediatr 2018;64:284-8.28977620
16 El Hasbaoui B, Mebrouk N, Saghir S, et al. Vitamin B_12_ deficiency: Case report and review of literature. Pan Afr Med J 2021;38:237.34046142
17 Acıpayam C, Güneş H, Güngör O, et al. Cerebral atrophy in 21 hypotonic infants with severe vitamin B_12_ deficiency. J Paediatr Child Health 2020;56:751-6.31868292
18 Dubaj C, Czyz K, Furmaga-Jablonska W. Vitamin B_12_ deficiency as a cause of severe neurological symptoms in breast fed infant - a case report. Ital J Pediatr 2020;46:40.32228659
19 Krishna G, Singh M, Gill BS, et al. Bilateral sixth nerve palsy with subdural hematoma: A unique presentation of B12 deficiency. Childs Nerv Syst 2023.37209197
20 Sharma NK, Bhattarai M, Baral K, et al. Vitamin B12 deficiency in an infant with neurological and hematological findings: A case report. Clin Case Rep 2023;11:e7770.37554579
21 Jain S, Beg S, Verma A, et al. To study the relationship between vitamin B12 deficiency in breast-fed infants and their mothers and its clinico hematological manifestations: A cross sectional study. Int J Life Sci Biotechnol Pharma Res 2023;12:671-6.
22 Tamura A, Nino N, Yamamoto N, et al. Vitamin B_12_ deficiency anemia in an exclusively breastfed infant born to an ileum-resected mother. Pediatr Neonatol 2019;60:579-80.31266738
23 Duggan C, Srinivasan K, Thomas T, et al. Vitamin B-12 supplementation during pregnancy and early lactation increases maternal, breast milk, and infant measures of vitamin B-12 status. J Nutr 2014;144:758-64.24598885
24 Pawlak R, Vos P, Shahab-Ferdows S, et al. Vitamin B-12 content in breast milk of vegan, vegetarian, and nonvegetarian lactating women in the United States. Am J Clin Nutr 2018;108:525-31.29931273
25 Siddiqua TJ, Ahmad SM, Ahsan KB, et al. Vitamin B_12_ supplementation during pregnancy and postpartum improves B_12_ status of both mothers and infants but vaccine response in mothers only: A randomized clinical trial in Bangladesh. Eur J Nutr 2016;55:281-93.25648738
26 Thomas S, Thomas T, Bosch RJ, et al. Effect of maternal vitamin B_12_ supplementation on cognitive outcomes in south Indian children: A randomized controlled clinical trial. Matern Child Health J 2019;23:155-63.30003521
27 Casterline JE, Allen LH, Ruel MT. Vitamin B-12 deficiency is very prevalent in lactating Guatemalan women and their infants at three months postpartum. J Nutr 1997;127:1966-72.9311952
28 Chebaya P, Karakochuk CD, March KM, et al. Correlations between maternal, breast milk, and infant vitamin B_12_ concentrations among mother-infant dyads in Vancouver, Canada and Prey Veng, Cambodia: An exploratory analysis. Nutrients 2017;9:E270.28287490
29 Greibe E, Lildballe DL, Streym S, et al. Cobalamin and haptocorrin in human milk and cobalamin-related variables in mother and child: A 9-mo longitudinal study. Am J Clin Nutr 2013;98:389-95.23783295
30 Williams AM, Chantry CJ, Young SL, et al. Vitamin B-12 concentrations in breast milk are low and are not associated with reported household hunger, recent animal-source food, or vitamin B-12 intake in women in rural Kenya. J Nutr 2016;146:1125-31.27075905
31 Wong S, Ahmad N, Rossetti AL. Vomiting as a presenting symptom of infantile vitamin B12 deficiency. Cureus J Med Sci 2022;14:e25134.35733471
32 Bahadir A, Reis PG, Erduran E. Oral vitamin B_12_ treatment is effective for children with nutritional vitamin B_12_ deficiency. J Paediatr Child Health 2014;50:721-5.24944005
33 Kleinman RE, Greer FR. Chapter 21, Water soluble vitamins, cobalamin. Pediatric Nutrition 7^th^ ed Elk Grove Village, IL: American Academy of Pediatrics; 2014:525-6.
34 Obeid R, Murphy M, Sole-Navais P, et al. Cobalamin status from pregnancy to early childhood: Lessons from global experience. Adv Nutr 2017;8:971-9.29141978
35 Batalha MA, Ferreira ALL, Freitas-Costa NC, et al. Factors associated with longitudinal changes in B-vitamin and choline concentrations of human milk. Am J Clin Nutr 2021;114:1560-73.34113959
36 Siddiqua TJ, Akhtar E, Haq MA, et al. Effects of vitamin B12 supplementation on oxidative stress markers and pro-inflammatory cytokines during pregnancy and postpartum among Bangladeshi mother-child pairs. BMC Nutr 2024;10:3.38172996
37 Dağ H, M Özberk Koç, Dikker O, et al. Vitamin B_12_ serum levels of six to nine-month-old infants according to feeding practices. J Pediatr Res 2020;7:1-6. doi:10.4274/jpr.galenos.2019.00377
38 de Benoist B. Conclusions of a WHO Technical Consultation on folate and vitamin B_12_ deficiencies. Food Nutr Bull 2008;29:S238-44.18709899
39 Deegan KL, Jones KM, Zuleta C, et al. Breast milk vitamin B-12 concentrations in Guatemalan women are correlated with maternal but not infant vitamin B-12 status at 12 months postpartum. J Nutr 2012;142:112-6.22131550
40 Carmel R. Biomarkers of cobalamin (vitamin B-12) status in the epidemiologic setting: a critical overview of context, applications, and performance characteristics of cobalamin, methylmalonic acid, and holotranscobalamin II. Am J Clin Nutr 2011;94:348S-58S.21593511
41 Stabler SP. Clinical practice. Vitamin B_12_ deficiency. N Engl J Med 2013;368:149-60.23301732
42 Thomas MR, Kawamoto J, Sneed SM, et al. The effects of vitamin C, vitamin B_6_, and vitamin B_12_ supplementation on the breast milk and maternal status of well-nourished women. Am J Clin Nutr 1979;32:1679-85.463805
43 Trugo NM, Sardinha F. Cobalamin and cobalamin-binding capacity in human milk. Nutr Res 1994;14:23-33. doi:10.1016/S0271-5317(05)80364-1
44 Sakurai T, Furukawa M, Asoh M, et al. Fat-soluble and water-soluble vitamin contents of breast milk from Japanese women. J Nutr Sci Vitaminol (Tokyo) 2005;51:239-47.16261995
45 Henjum S, Manger M, Hampel D, et al. Vitamin B_12_ concentrations in milk from Norwegian women during the six first months of lactation. Eur J Clin Nutr 2020;74:749-56.32001810
46 Neumann CG, Oace SM, Chaparro MP, et al. Low vitamin B_12_ intake during pregnancy and lactation and low breastmilk vitamin 12 content in rural Kenyan women consuming predominantly maize diets. Food Nutr Bull 2013;34:151-9.23964388
47 Allen LH. B vitamins in breast milk: Relative importance of maternal status and intake, and effects on infant status and function. Adv Nutr 2012;3:362-9.22585913
48 Thomas MR, Sneed SM, Wei C, et al. The effects of vitamin C, vitamin B_6_, vitamin B_12_, folic acid, riboflavin, and thiamin on the breast milk and maternal status of well-nourished women at 6 months postpartum. Am J Clin Nutr 1980;33:2151-6.7424809
49 Allen LH, Hampel D, Shahab-Ferdows S, et al. Antiretroviral therapy provided to HIV-infected Malawian women in a randomized trial diminishes the positive effects of lipid-based nutrient supplements on breast-milk B vitamins. Am J Clin Nutr 2015;102:1468-74.26537941
50 Lweno ON, Sudfeld CR, Hertzmark E, et al. Vitamin B_12_ is low in milk of early postpartum women in urban Tanzania, and was not significantly increased by high dose supplementation. Nutrients 2020;12:963.32244279
51 Eneroth H, El Arifeen, S, Persson LA, et al. Maternal multiple micronutrient supplementation has limited impact on micronutrient status of Bangladeshi infants compared with standard iron and folic acid supplementation. J Nutr 2010;140:618-24.20053938
52 Srinivasan K, Thomas S, Anand S, et al. Vitamin B-12 supplementation during pregnancy and early lactation does not affect neurophysiologic outcomes in children aged 6 years. J Nutr 2020;150:1951-7.32470975

## Substance Identification

### Substance Name

Vitamin B_12_

### CAS Registry Number

68-19-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vitamin B Complex

Vitamins